# Peanut

## Drug Levels and Effects

### Summary of Use during Lactation

Peanuts (Arachis hypogaea) contain carbohydrates, fat, and protein. Some of the proteins in peanuts are considered to be allergens that can lead to allergic reactions. Cooked, peanuts are reportedly used in Africa and Asia as a galactogogue and to improve the quality of colostrum;[1,2] however, no scientifically valid clinical trials support this use. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[3,4]

The peanut protein allergens Ara h 1, 2 and 6 have been detected in breastmilk and some case reports and series have implicated maternal ingestion of peanuts during breastfeeding to peanut allergy in their breastfed infants.[5-8] Studies to determine whether maternal peanut ingestion during breastfeeding causes infant peanut allergy have come to conflicting conclusions. A more recent subpopulation analysis of a controlled study found that if mothers consume <5 grams per week of peanuts while breastfeeding, it may reduce peanut sensitization and possibly reduce allergy in high-risk infants at 5 years of age.[9] This finding seems to have been confirmed in a longitudinal population study and pilot trial of peanut ingestion during breastfeeding.[10,11] In the United States and United Kingdom, mothers were advised to avoid peanuts during pregnancy and breastfeeding in the late 1990s, but these recommendations have been withdrawn because of a lack of evidence of a reduction in peanut allergy.[12,13] Currently, international guidelines recommend against any food avoidance during breastfeeding to reduce the risk of allergies in infants.[14]

### Drug Levels

Maternal Levels. Twenty-three nursing mothers consumed 50 grams of dry roasted peanuts after donating a baseline milk sample. Milk samples were then collected at various times over the next 12 hours. The peanut proteins Ara h 1 and Ara h 2 were detected in the breastmilk of 11 of the 23 women, with a mean peak concentration of 222 mcg/L. In most of the women with detectable peanut protein, the peak concentration occurred in the first 2 hours and was near baseline at 3 hours post ingestion, but one woman had a peak protein level 6 hours after ingestion; she and another woman still had detectable peanut protein in their milk 8 hours after peanut ingestion. No difference between the mothers who did and did not secrete peanut allergen in their milk was found in age, time postpartum or atopic history.[15]

Two women ingested 30 grams of commercial roasted peanuts, either on an empty stomach or after breakfast on 5 occasions. Milk samples were collected for either 2 or 26 hours. In one woman, the peanut protein Ara h 6 was detectable in milk as early as 10 minutes after peanut ingestion on an empty stomach, with a peak concentration of 3.37 mcg/L. It declined thereafter but was still detectable 23 hours after ingestion. Taking the peanuts after a meal decreased and slightly delayed the concentrations in milk, with a concentration of 550 ng/L at 60 min post-feeding. In the other woman, the allergen was found as soon as 10 minutes after ingestion at about 10 ng/L, and a higher excretion peak was then observed between 40 and 60 minutes, reaching values above 200 ng/L. The allergens are bound to the IgE of peanut-sensitive patients. Ara h 6–IgG and Ara h 6–IgA immune complexes could also be detected in milk with a slight delay. IgA and IgG immune complexes followed similar kinetics over 24 hours, with a maximum of secretion observed at 220 minutes.[16]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a study on the infants of atopic parents, mothers were randomized either to standard infant feeding practices (n = 185) or to avoidance of peanuts and other food allergens during the third trimester of pregnancy and breastfeeding (n = 103). Testing at 12 months of age found a slightly reduced frequency of positive skin tests for peanut allergy in the avoidance group (n = 4) compared to the control group (n = 7), and no difference between the groups in the frequency of clinical allergy to peanuts.[17]

In a case-control study, mothers of infants with peanut allergies (n = 202) or control infants (n = 201) were given a questionnaire to determine the extent of peanut ingestion during pregnancy and breastfeeding. No differences were noted in infant age, sex ratio, breastfeeding and several other variables. The mothers of peanut-allergic infants were 2.3 times more likely to have consumed peanuts during breastfeeding than mothers of the control infants, although peanut ingestion during pregnancy was a stronger predictor of peanut allergy.[18]

In a cohort study, 503 infants with food allergies, but no reported peanut allergies, were assessed for peanut allergy based on IgE antibody levels against peanuts. Although a correlation was found between maternal ingestion of peanuts during pregnancy and later infant peanut allergy, no correlation was found with maternal ingestion during breastfeeding.[19]

An analysis of a birth cohort study in Canada found that regardless of breastfeeding, sensitization was significantly less likely among infants consuming peanut, with 2.3% sensitized among those introduced to peanut early without breastfeeding and 2.8% sensitized among those introduced to peanut early while breastfeeding. Beginning at 3 years and especially at 5 years, the prevalence of sensitization was further reduced among children who had been introduced to peanut while breastfeeding.[10]

In a pilot trial, nursing mothers were randomized to ingest either 20 or 60 peanuts per week from birth to 6 months of lactation. Mothers achieved an 80% adherence to the regimen and 77% were still breastfeeding at 6 months of age, mostly exclusively. The ingestion of peanuts by the nursing mother in either amount appeared to reduce the risk of peanut sensitization (prick test) and allergy at 12 months of age.[11]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Scott CR, Jacobson H. A selection of international nutritional and herbal remedies for breastfeeding concerns. Midwifery Today Int Midwife 2005;75:38–9.16320878
2 Panjaitan RGP, Aprilianti M, Titin, et al. Genetic potential of medicinal plants and their role in improving colostrum production in Dayak Kanayatn tribe, Bengkayang Regency, Indonesia. Sabrao Journal of Breeding and Genetics 2025;57:115–25. doi:10.54910/sabrao2025.57.1.12
3 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
4 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
5 van Asperen PP, Kemp AS, Mellis CM. Immediate food hypersensitivity reactions on the first known exposure to the food. Arch Dis Child 1983;58:253–6.6847227
6 Gerrard JW, Perelmutter L. IgE-mediated allergy to peanut, cow's milk and egg in children with special reference to maternal diet. Ann Allergy 1986;56:351–4.3754399
7 Seidman D. Postpartum psychiatric illness: The role of the pediatrician. Pediatr Rev 1998;19:128–31.9557063
8 Martin-Muñoz M, Pineda F, Bobolea I, et al. Hidden allergens in breast milk. Allergy 2009;64 (Suppl. 90):479. doi:10.1111/j.1398-9995.2009.02076.x
9 Landau T, Vakulenko-Lagun B, Brandwein M. The protective effect of moderate maternal peanut consumption on peanut sensitization and allergy. Ann Allergy Asthma Immunol 2023;131:231–8.37098405
10 Azad MB, Dharma C, Simons E, et al. Reduced peanut sensitization with maternal peanut consumption and early peanut introduction while breastfeeding. J Dev Orig Health Dis 2021;12:811–8.33292902
11 Palmer DJ, Silva DT, Prescott SL. Maternal peanut and egg consumption during breastfeeding randomized pilot trial. Pediatr Allergy Immunol 2022;33:e13845.36156821
12 Kmietowicz Z. Advice to pregnant women to avoid eating peanuts should be withdrawn, says Lords committee. BMJ 2007;335:633.17901489
13 Greer FR, Sicherer SH, Burks AW. Effects of early nutritional interventions on the development of atopic disease in infants and children: the role of maternal dietary restriction, breastfeeding, timing of introduction of complementary foods, and hydrolyzed formulas. Pediatrics 2008;121:183–91.18166574
14 Venter C, Smith PK, Fleischer DM. Food allergy prevention: Where are we in 2023? Asia Pac Allergy 2023;13:15–27.37389093
15 Vadas P, Wai Y, Burks W, et al. Detection of peanut allergens in breast milk of lactating women. JAMA 2001;285:1746–8.11277829
16 Bernard H, Ah-Leung S, Drumare MF, et al. Peanut allergens are rapidly transferred in human breast milk and can prevent sensitization in mice. Allergy 2014;69:888–97.24773443
17 Zeiger RS, Heller S, Mellon MH, et al. Effect of combined maternal and infant food-allergen avoidance on development of atopy in early infancy: A randomized study. J Allergy Clin Immunol 1989;84:72–89.2754147
18 DesRoches A, Infante-Rivard C, Paradis L, et al. Peanut allergy: Is maternal transmission of antigens during pregnancy and breastfeeding a risk factor? J Investig Allergol Clin Immunol 2010;20:289–94.20815306
19 Sicherer SH, Wood RA, Stablein D, et al. Maternal consumption of peanut during pregnancy is associated with peanut sensitization in atopic infants. J Allergy Clin Immunol 2010;126:1191–7.21035177

## Substance Identification

### Substance Name

Peanut

### Scientific Name

Arachis hypogaea

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Galactogogues

Phytotherapy

Plants, Medicinal